# Secobarbital

CASRN: 76-73-3

## Drug Levels and Effects

### Summary of Use during Lactation

Because there is little published experience with secobarbital during breastfeeding, other agents may be preferred, especially while nursing a newborn or preterm infant. If secobarbital is used, monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Maternal Levels. Secobarbital was detected, but not quantified, 24 hours after an unspecified dose in a woman who was 4 days postpartum.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Secobarbital 200 mg given intravenously during labor 10 minutes to 3 hours before delivery for obstetric sedation reduced the sucking behavior of the newborn infants. The number of sucks, sucking pressure and total consumption of artificial feeding from the testing device were reduced Secobarbital 200 mg given intravenously during labor 10 minutes to 3 hours before delivery for obstetric sedation reduced the sucking behavior of the newborn infants. The number of sucks, sucking pressure and total consumption of artificial feeding from the testing device were reduced substantially.[2]

In one small study, women given promethazine with meperidine and secobarbital during labor, had the time to lactogenesis II prolonged by 14 hours. Women given meperidine or secobarbital without promethazine had lactogenesis II prolonged 7 hours compared to unmedicated women, but the difference was not statistically significant.[3]

### Alternate Drugs to Consider

Zaleplon, Zolpidem

### References

1 Horning MG, Stillwell WG, Nowlin J, et al. Identification and quantification of drugs and drug metabolites in human breast milk using GC-MS-COM methods. Mod Probl Paediatr 1975;15:73-9.
2 Kron RE, Stein M, Goddard KE. Newborn sucking behavior affected by obstetric sedation. Pediatrics 1966;37:1012-6.5949020
3 Hildebrandt HM. Maternal perception of lactogenesis time: A clinical report. J Hum Lact 1999;15:317-23.10776182

## Substance Identification

### Substance Name

Secobarbital

### CAS Registry Number

76-73-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Barbiturates

Hypnotics and Sedatives

GABA Modulators